# Sea Moss

## Drug Levels and Effects

### Summary of Use during Lactation

Sea moss or Irish moss (Chondrus crispus) is a type of red seaweed that is used as food and medicine, although no medicinal value has been proven. Sea moss contains carrageenan, which is used as food additive and other polysaccharides (carbohydrates). It also contains numerous minerals, including iodine and some toxic heavy metals such as arsenic, lead, cadmium and mercury that come from the water where it was grown.[1] Maternal consumption of excess iodine from seaweed has caused thyroid suppression in breastfed infants.[2-4] Sea moss should be avoided during breastfeeding unless the levels of iodine and heavy metals have been shown to be low enough to be safe.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 López-Hortas L, Caleja C, Pinela J, et al. Comparative evaluation of physicochemical profile and bioactive properties of red edible seaweed Chondrus crispus subjected to different drying methods. Food Chem 2022;383:132450 35182861
2 Chung HR, Shin CH, Yang SW, et al. Subclinical hypothyroidism in Korean preterm infants associated with high levels of iodine in breast milk. J Clin Endocrinol Metab 2009;94:4444-7 19808851
3 Emder PJ, Jack MM. Iodine-induced neonatal hypothyroidism secondary to maternal seaweed consumption: A common practice in some Asian cultures to promote breast milk supply. J Paediatr Child Health 2011;47:750-2 21276114
4 Hulse T. Transient neonatal hypothyroidism resulting from maternal ingestion of a traditional Korean seaweed soup. Horm Res Paediatr 2012;78 (Suppl 1):127-8.doi:10.1159/000343182 22832081

## Substance Identification

### Substance Name

Sea Moss

### Scientific Name

Chondrus crispus

### Drug Class

Breast Feeding

Lactation

Milk, Human

Seaweeds

Edible Seaweeds